# Infliximab

CASRN: 170277-31-3

## Drug Levels and Effects

### Summary of Use during Lactation

Infliximab is usually either not detectable in breastmilk or detectable at very low levels in milk. Absorption of the drug from milk by the infant is minimal. The measurement of minute concentrations in the milk of some women raises the possibility of local immune suppression in the gastrointestinal tract, but levels were not high enough to be of concern for systemic immunosuppression.[1] Follow-up of infants exposed in utero and breastfed during maternal infliximab therapy have found no adverse effects on the development of breastfed infants or increase the risk of infections. Waiting for at least 2 weeks postpartum to resume therapy suspended during pregnancy may minimize transfer to the infant.[2] However, in infants of mothers who received infliximab during late pregnancy, continued use while breastfeeding does not prolong infliximab elimination by the infant.[3] Numerous experts and professional guidelines have stated that infliximab is a low risk to the nursing infant and acceptable to use during breastfeeding.[4-10] Anti-TNF agents appear to reduce the levels of tumor necrosis factor and IP-10 in the milk of mothers with inflammatory bowel disease in the early postpartum period.[11] This reduction in TNF might lead to decreased milk production, so extra lactation support might be necessary in women taking infliximab.

### Drug Levels

Maternal Levels. A nursing mother with Crohn's disease (time postpartum not stated) was given a single 5 mg/kg dose of infliximab by intravenous infusion. Milk samples taken 24 hours and 1 week after the dose had undetectable (<60 mcg/L) levels of infliximab.[12]

A woman who was 4 months postpartum received 2 doses of infliximab. Milk levels were measured after the first dose of 160 mg and second dose of 165 mg, but the time between the 2 doses was not stated. The first milk sample was obtained 10 days after the first dose. Milk infliximab levels increased gradually (values not stated) over the next 10 days. After the second dose, milk infliximab levels increased further, with the highest infliximab concentration of 473 mcg/L measured one day after the second dose.[13]

A woman with Crohn's disease received infliximab 10 mg/kg at 2 and 10 weeks postpartum. Infliximab was not detectable in breastmilk with an ELISA assay (assay sensitivity not specified) at 6, 10 or 13 weeks postpartum.[14]

A woman with severe Crohn's disease received infliximab 1000 mg (10 mg/kg) intravenously every 4 weeks during pregnancy and lactation. She received a dose on an unstated day postpartum, then breastmilk samples were collected daily (times not stated) once before and daily for 30 days after the dose. None of the samples had detectable infliximab (<5 mcg/L) using an ELISA assay.[15]

Three women with Crohn's disease received infliximab during pregnancy and postpartum. Single breastmilk samples were obtained from each woman after a postpartum dose of 5 mg/kg of infliximab. Samples were collected 7, 5, and 43 days, respectively, after their prior dose. Infliximab was undetectable (<100 mcg/L) in all breastmilk samples.[16]

Three women with Crohn's disease received an intravenous infusion of infliximab 5 mg/kg postpartum for a disease flare and discontinued nursing. Milk samples were obtained before and after the infusion. Milk samples were also obtained from 8 nursing mothers who did not receive infliximab. Infliximab was undetectable (<10 mcg/L) in all of the pre-infusion samples and in those from the untreated mothers. Infliximab was detected in breastmilk samples obtained after the infusion in all 3 women. Infliximab was detectable 12 hours after the infusion and peaked at 75 to 105 mcg/L in 2 to 3 days after the infusion in 2 patients. In a third, one sample obtained 2 days after the infusion was about 20 mcg/L. The assay used in this series was more sensitive than those used previously and allowed the very low infliximab concentrations to be measured.[1]

Two mothers received infliximab 300 mg intravenously for inflammatory bowel disease. Breastmilk infliximab was 200 mcg/L in one mother (time after dose not stated), which was about 4.3% of her serum concentration. The second mother began infliximab at 3 months postpartum. Her breastmilk infliximab levels were 94.6 mcg/L on day 1 after the first dose and 119.7 mcg/L on day 4 after the dose.[17]

Three women with inflammatory bowel disease who received postpartum infliximab infusions (doses not specified) had milk samples analyzed for the drug for 5 days after the infusion. The assay method was somewhat unreliable in this study. In the first patient, infliximab was detectable in breastmilk only on days 4 and 6 after the infusion, with values of about 100 mcg/L. After the second infusion, the highest milk concentration of about 130 mcg/L occurred after about 30 hours. Subsequent levels were lower over the next 5 days. In a second patient, infliximab was found in milk shortly after the infusion with the highest concentration of 300 mcg/L occurring at 3.3 days after the dose. A third patient had detectable infliximab in milk on days 2 and 4, with the highest level of about 100 mcg/L on day 4.[18]

In a multi-center study of women with inflammatory bowel disease in pregnancy (the PIANO registry), 29 women receiving infliximab provided milk samples at 1, 12, 24, and 48 hours after drug administration. Some also provided samples at 72, 96, 120, and 168 hours after drug administration. Nineteen of the women had detectable (>0.01 mg/L) infliximab levels in milk. Peak concentrations in breastmilk ranged from 0.15 to 0.74 mg/L and occurred at 24 to 48 hours after the dose. Seventeen women had detectable milk levels at 48 hours with a mean concentration of 0.2 mg/L and 5 of 8 women who submitted a 168 hour sample had detectable infliximab in milk.[19]

Infant Levels. A woman with Crohn's disease received infliximab during pregnancy, with the last of five 10 mg/kg doses 2 weeks before delivery. Doses were also given 2 and 10 weeks postpartum. She breastfed her infant from birth to 6 weeks, discontinued breastfeeding for 3 weeks and then restarted breastfeeding (extent not stated) at week 11 postpartum. Maternal and infant serum infliximab levels were equal when they were first measured at 6 weeks postpartum. The infant's serum infliximab steadily decreased over the next 7 weeks. The authors concluded that the initial high infant serum level was from transplacental passage of infliximab because the drug was undetectable in milk and the serum level dropped despite breastfeeding.[14]

Two infants were breastfed (extent not stated) by mothers who received 5 mg/kg doses of infliximab during pregnancy and breastfeeding. Infliximab was discontinued at or before 32 weeks of the pregnancy and restarted within 2 weeks postpartum. Infant serum samples were obtained 5 days after the mother's previous infliximab dose in one when the infant was 15 days old and 43 days after the mother's dose at 57 days of age in the other infant. Infliximab was undetectable (<100 mcg/L) in both infants' serum.[16]

Two mothers received infliximab 300 mg intravenously for inflammatory bowel disease. The infant of the first woman had an undetectable serum infliximab level 3 weeks after the last dose of infliximab at 34 weeks postpartum. The second woman exclusively breastfed her infant for 3 months, then received a single intravenous dose of infliximab 300 mg and began partially breastfeeding her infant. Four weeks after beginning infliximab and 5 days after the second infliximab dose, her infant had a serum concentration of 1.7 mcg/L, which was 2.2% of the simultaneous maternal serum infliximab concentration.[17]

An infant was born at week 37 of gestation to a mother with ulcerative colitis who was receiving long-term therapy with mesalamine 4 grams daily throughout pregnancy received inductions series of infliximab 5 mg/kg in weeks 20 and 31 of pregnancy for disease flares. She continued to receive infliximab infusions every 8 to 12 weeks, while the baby was breastfed (extent not stated) until 14 weeks of age. The infant's infliximab serum concentration at 16 weeks after birth was 0.6 mg/L but was undetectable (<0.05mg/L) at 28 weeks of age. The serum concentration at 16 weeks was judged to have been a result of placental passage of the drug from mother to infant.[20]

A woman receiving infliximab (dosage not stated) every 7 weeks for Crohn's disease became pregnant and infliximab was continued until week 25 of pregnancy. Upon cesarean section delivery at week 37, her serum infliximab concentration was 1.41 mg/L. She partially breastfed her dizygotic twins for 6 weeks. Serial serum samples of the infants were taken at delivery and 3, 6, 9, 12, and 15 months of age. The male infant had serum infliximab levels of 3.06, 1.52, 0.2, 0.06, 0.03 mg/L, and undetectable at these times. The female infant had serum infliximab levels of 2.46, 0.52, 0.21, 0.11 and 0.03 mg/L, and undetectable at these times.[21]

A woman was treated for psoriatic arthritis with infliximab 6 mg/kg every 4 weeks from week 18 to week 26 of pregnancy when it was stopped. She delivered a healthy infant and resumed infliximab at 5 weeks postpartum at 6 mg/kg every 4 weeks initially, increasing to every 8 weeks over a year. The infant serum infliximab concentration was 4.46 mg/L at 24 days of age before infliximab was resumed, 0.19 mg/L at 155 days of age and undetectable (detection limit not stated) at 278 days of age. The extent of breastfeeding and exact days of drug administration relative to infant serum concentrations were not reported.[22]

A woman was treated for psoriasis with infliximab 6 mg/kg every 8 weeks until she was 26 weeks pregnant. Her infant was born at week 38 by cesarean section. She restarted infliximab at 5 weeks postpartum and received it every 4 weeks for one year while breastfeeding her infant (extent not stated). The infant’s serum infliximab concentration was 4.46 mg/L at 24 days of age, 0.19 mg/L at 155 days of age, and below the limit of detection (not stated) at 278 days of age.[23]

### Effects in Breastfed Infants

A retrospective chart review of patients who received infliximab during pregnancy found that 5 mothers breastfed their infants during infliximab therapy at a dose of 5 mg/kg. No other patient details were reported and no adverse effects were reported in the infants, although observation during breastfeeding was not the purpose of the study.[24]

A woman with Crohn's disease received infliximab 5 mg/kg intravenously every 8 weeks throughout pregnancy and during lactation. The infant was reported to be good condition without any evidence of illnesses.[25]

An infant was born to a mother who received infliximab 10 mg/kg 5 times during pregnancy at 6- to 8-week intervals. A maternal dose of 10 mg/kg was given at 2 weeks postpartum. The infant was breastfed for 6 weeks, discontinued for 3 weeks and then reinstated at 9 weeks of age (extent of nursing not stated). Another 10 mg/kg dose was given to the mother at 10 weeks postpartum. The infant underwent a formal evaluation of the immune system and found to have normal immune markers and responses. The infant reportedly grew and developed normally throughout the first year of life.[14]

An infant was breastfed (extent not stated) for up to 4 months by a mother who was taking infliximab (dosage not stated) and azathioprine 150 mg daily for inflammatory bowel diseases. The infant was followed regularly for 22 months of age and found to have a normal growth rate, and no history of recurrent infections.[26]

A woman with severe Crohn's disease received infliximab 1000 mg (10 mg/kg) intravenously every 4 weeks during pregnancy and lactation. The extent and duration of breastfeeding were not reported. The child had no developmental abnormalities noted at 27 months of age.[15]

Three infants were breastfed (extent not stated) during maternal infliximab therapy at a dose of 5 mg/kg every 8 weeks. Infants were followed for almost 1 year and found to have no unusual number or types of infections and all seroconverted after their routine childhood immunizations.[16]

A 24-year-old woman with Crohn's disease received infliximab 5 mg/kg every 8 weeks during pregnancy until 33 weeks gestation. After delivering at term, she received her next infliximab dose at 1 week postpartum. The infant was breastfed (extent not stated) and received all vaccinations, except rotavirus, on schedule.[27]

A woman with severe psoriasis was treated during pregnancy and postpartum with infliximab 5 mg/kg intravenously every 8 weeks. Her last doses of infliximab before delivery were at weeks 20 and 29 of pregnancy. The drug was continued postpartum, although the timing of the first postpartum dose was not stated. Her infant was breastfed for 1 month and developed normally.[28]

A woman with Crohn's disease used infliximab 5 mg/kg every 8 weeks during pregnancy and postpartum. During breastfeeding (extent not stated) she also received sulfasalazine 4 g/day and prednisone 60 mg/day in a tapering schedule. At 6 months of age, the infant was asymptomatic with regular weight gain.[29]

Two women received infliximab 300 mg intravenously for treatment of inflammatory bowel disease. One woman nursed her infant (extent not stated), and the other began partial breastfeeding her infant at 3 months of age when infliximab was begun. She breastfed for approximately 5 weeks (2 doses) before discontinuing breastfeeding. At 22 and 18 months of age, respectively, neither infant had any signs of adverse drug reactions, allergic reactions or severe infections leading to hospitalization. The first infant had a low birth weight but caught up and reached the 75th percentile at the age of 11 months. Developmental milestones were reached on time by both infants.[17]

A woman with ulcerative colitis was receiving long-term therapy with mesalamine 4 grams daily throughout pregnancy received inductions series of infliximab 5 mg/kg in weeks 20 and 31 of pregnancy for disease flares. She continued to receive infliximab infusions every 8 to 12 weeks, while the baby was breastfed (extent not stated) until 14 weeks of age. The infant received routine vaccinations (diphtheria, tetanus, pertussis, injectable polio, Haemophilus influenzae b, and pneumococcal vaccines) at 3, 5 and 12 months with no signs of adverse effects from them, or signs of allergic or infectious diseases. Development at 13 months of age was normal.[20]

A woman receiving infliximab (dosage not stated) every 7 weeks for Crohn's disease became pregnant and infliximab was continued until week 25 of pregnancy. She partially breastfed her dizygotic twins for 6 weeks. Her infants had detectable serum infliximab levels until 12 months of age. The boy developed normally. The girl was diagnosed with a non-significant atrial septal defect at the age of 6 weeks. At the age of 18 months, she was admitted to hospital due to asthmatic bronchitis. She was seen as an outpatient at the pediatric department due to late gross motor function development, but her monitoring was terminated at the age of 20 months due to normal development.[21]

Three women receiving infliximab for severe psoriasis breastfed 4 infants (2 pregnancies in 1 woman). No adverse effects were reported in the infants, although the dosage of infliximab and the extent of breastfeeding were not reported.[30]

In a multi-center study of women with inflammatory bowel disease in pregnancy (the PIANO registry), 168 women received infliximab while breastfeeding their infants. Among those who received infliximab or another biologic agent while breastfeeding, infant growth, development or infection rate was no different from infants whose mothers received no treatment. An additional 68 women received a biologic agent plus a thiopurine. Infant outcomes were similar in this group.[19]

A woman treated with psoriatic arthritis with infliximab 6 mg/kg every 4 weeks from week 18 to week 26 of pregnancy when it was stopped. She delivered a healthy infant and resumed infliximab at 5 weeks postpartum. Her infant was breastfed (extent not stated) and did not develop any sever infections over the first 278 days of life.[22]

A multicenter, retrospective observational study in France reported the outcomes of infants who were breastfed by mothers taking a TNF inhibitor during pregnancy or postpartum for inflammatory bowel disease. Of 153 women who continued anti-TNF therapy postpartum, 94 were taking infliximab. The exact number of infants breastfed during maternal infliximab therapy was not stated. Of the 153 cases, 68 breastfed their infants for a mean duration of 61 days (range 31 to 111 days). Thirty of the breastfed infants were born to mothers who had received an ant-TNF agent after 26 weeks of pregnancy and were likely born with blood levels of the agent. None of the breastfed infants had any infectious complications.[31]

A multicenter study in Spain prospectively followed women treated for inflammatory bowel disease with biological agents, mostly anti-TNF agents. Overall, 29% of infants exposed to a biologic agent were also exposed to azathioprine or mercaptopurine and almost all were exposed during both pregnancy and lactation. Twenty-nine infants were exposed to infliximab during lactation for a mean duration of 46.8 weeks. No adverse impact of biologics exposure was found on the psychomotor development of infants for up to 1 year of age.[32]

### Effects on Lactation and Breastmilk

Fifty-seven lactating women, 26 with inflammatory bowel disease (IBD) and 31 without had tumor necrosis factor (TNF) and chemokines (IP-10, MCP-1, and MIP-1β) measured at 2 to 6 weeks postpartum (early lactation) and again at 11 to 16 weeks (mid-lactation) postpartum. The women with IBD who were receiving either adalimumab (n = 5) or infliximab (n = 4) had lower levels of TNF and Interferon gamma-induced protein 10 (IP-10) in their milk in early lactation sampling than women with IBD who were not taking a TNF inhibitor. No differences were found between either IBD group and women without IBD at either time point nor between any of the groups at mid-lactation.[11]

An analysis of the US Food and Drug Administration’s FAERS database of 7,022 spontaneous adverse reaction reports of anti-TNF drugs found that they may cause an increased risk of lactation insufficiency and disorders. Drugs that were studied included adalimumab, infliximab, golimumab, certolizumab, and etanercept. The authors noted that TNF alpha is involved in milk production, adding biological plausibility to the findings.[33]

### Alternate Drugs to Consider

(Inflammatory Bowel Disease) Adalimumab, Certolizumab Pegol; (Psoriasis) Adalimumab, Etanercept, Phototherapy, Tretinoin; (Rheumatoid Arthritis) Adalimumab, Certolizumab Pegol, Etanercept, Tocilizumab

### References

1 Ben-Horin S, Yavzori M, Kopylov U, et al. Detection of infliximab in breast milk of nursing mothers with inflammatory bowel disease. J Crohns Colitis 2011;5:555–8.22115374
2 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350–66.36931808
3 Julsgaard M, Christensen LA, Gibson PR, et al. Concentrations of adalimumab and infliximab in mothers and newborns, and effects on infection. Gastroenterology 2016;151:110–9.27063728
4 Mahadevan U, Robinson C, Bernasko N, et al. Inflammatory bowel disease in pregnancy clinical care pathway: A report from the American Gastroenterological Association IBD Parenthood Project Working Group. Gastroenterology 2019;156:1508–24.30658060
5 Sammaritano LR, Bermas BL, Chakravarty EE, et al. 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529–56.32090480
6 Yeung J, Gooderham MJ, Grewal P, et al. Management of plaque psoriasis with biologic therapies in women of child-bearing potential consensus paper. J Cutan Med Surg 2020;24 (1_Suppl):3S–14S.32500730
7 Russell MD, Dey M, Flint J, et al. British Society for Rheumatology guideline on prescribing drugs in pregnancy and breastfeeding: Immunomodulatory anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford) 2023;62:e48–e88.36318966
8 Torres J, Chaparro M, Julsgaard M, et al. European Crohn's and Colitis Guidelines on Sexuality, Fertility, Pregnancy, and Lactation. J Crohns Colitis 2023;17:1–27.36005814
9 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311
10 Mahadevan U, Seow CH, Barnes EL, et al. Global consensus statement on the management of pregnancy in inflammatory bowel disease. Clin Gastroenterol Hepatol 2025;23 (11S):S1–S60.40874901
11 Sepiashvili L, Brydon A, Koroshegyi C, et al. Reduction of tumor necrosis factor (TNF) in milk of women receiving anti-TNF antibody. Pediatr Res 2025;97:1935–42.39487320
12 Peltier M, James D, Ford J, et al. Infliximab levels in breast-milk of a nursing Crohn's patient. Am J Gastroenterol 2001;96:S312. doi:10.1016/S0002-9270(01)03768-6
13 Förger F, Matthias T, Oppermann M, et al. Infliximab in breast milk. Lupus 2004;13:753. doi:10.1191/0961203304lu2014xx
14 Vasiliauskas EA, Church JA, Silverman N, et al. Case report: Evidence for transplacental transfer of maternally administered infliximab to the newborn. Clin Gastroenterol Hepatol 2006;4:1255–8.17045211
15 Stengel JZ, Arnold HL. Is infliximab safe to use while breastfeeding? World J Gastroenterol 2008;14:3085–7.18494064
16 Kane S, Ford J, Cohen R, et al. Absence of infliximab in infants and breast milk from nursing mothers receiving therapy for Crohn's disease before and after delivery. J Clin Gastroenterol 2009;43:613–6.19142167
17 Fritzsche J, Pilch A, Mury D, et al. Infliximab and adalimumab use during breastfeeding. J Clin Gastroenterol 2012;46:718–9.22858514
18 Grosen A, Julsgaard M, Kelsen J, et al. Infliximab concentrations in the milk of nursing mothers with inflammatory bowel disease. J Crohns Colitis 2014;8:175–6.24090905
19 Matro R, Martin CF, Wolf D, et al. Exposure concentrations of infants breastfed by women receiving biologic therapies for inflammatory bowel diseases and effects of breastfeeding on infections and development. Gastroenterology 2018;155:696–704.29857090
20 Steenholdt C, Al-Khalaf M, Ainsworth MA, et al. Therapeutic infliximab drug level in a child born to a woman with ulcerative colitis treated until gestation week 31. J Crohns Colitis 2012;6:358–61.22405174
21 Vestergaard T, Kammerlander H, Brock B, et al. Immunoglobulin and infliximab concentrations in dichorionic twins exposed to infliximab in utero. J Crohns Colitis 2017;11:1152–3.28333258
22 Takeuchi S, Kamata M, Uchida H, et al. Serum infliximab level in an infant delivered from a mother with psoriatic arthritis receiving infliximab. J Dermatol 2020;47:e28–e9.31621097
23 Ishikawa T, Takeuchi S, Kamata M, et al. Serum infliximab level in an infant delivered from a mother with psoriatic arthritis receiving infliximab J Am Acad Dermatol 2020;83 (6 Suppl):AB5. doi:10.1016/j.jaad.2020.06.109
24 Mahadevan U, Kane S, Sandborn WJ, et al. Intentional infliximab use during pregnancy for induction or maintenance of remission in Crohn's disease. Aliment Pharmacol Ther 2005;21:733–8.15771759
25 Tursi A. Effect of intentional infliximab use throughout pregnancy in inducing and maintaining remission in Crohn's disease. Dig Liver Dis 2006;38:439–40.16563889
26 Bernard N, Garayt C, Chol F, et al. Prospective clinical and biological follow-up of three breastfed babies from azathioprine-treated mothers. Fundam Clin Pharmacol 2007;21 (Suppl. 1):62–3. doi:10.1111/j.1472-8206.2007.00481.x
27 Hou JK, Mahadevan U. A 24-year-old pregnant woman with inflammatory bowel disease. Clin Gastroenterol Hepatol 2009;7:944–7.19410016
28 Puig L, Barco D, Alomar A. Treatment of psoriasis with anti-TNF drugs during pregnancy: Case report and review of the literature. Dermatology 2010;220:71–6.19940453
29 Correia LM, Bonilha DQ, Ramos JD, et al. Inflammatory bowel disease and pregnancy: Report of two cases treated with infliximab and a review of the literature. Eur J Gastroenterol Hepatol 2010;22:1260–4.20671559
30 Lund T, Thomsen SF. Use of TNF-inhibitors and ustekinumab for psoriasis during pregnancy: A patient series. Dermatol Ther 2017;30:e12454.28071837
31 Bendaoud S, Nahon S, Beaugerie L, et al. Risk of anti-TNF therapy on pregnancy, breastfeeding, live vaccines and related information in patients with inflammatory bowel disease: Real-world data from a nationwide study. Dig Liver Dis 2024;56:2038–44.38981787
32 Palomino L, Rodríguez-Belvís MV, Casanova MJ, et al. Psychomotor development in infants following maternal exposure to biologics: Results from the DUMBO registry. Clin Gastroenterol Hepatol 2026;24:1688–701.40518059
33 Yan Z, Chen H, Sun J, et al. Divergent safety profiles of TNF inhibitors in pregnancy: A comprehensive pharmacovigilance analysis of the FAERS database. J Autoimmun 2026;160:103553.41932089

## Substance Identification

### Substance Name

Infliximab

### CAS Registry Number

170277-31-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antirheumatic Agents

Dermatologic Agents

Gastrointestinal Agents

Tumor Necrosis Factor Inhibitors